# Trimethoprim

CASRN: 738-70-5

## Drug Levels and Effects

### Summary of Use during Lactation

Because of the low levels of trimethoprim in breastmilk, amounts ingested by the infant are small and would not be expected to cause any adverse effects in breastfed infants.

### Drug Levels

Maternal Levels. In 20 mothers in the immediate postpartum period given oral trimethoprim, peak milk levels occurred 3 hours after the dose. In 14 of these women who received a daily dosage of 320 mg, the peak milk level averaged 2.4 mg/L and the trough averaged 1 mg/L. In 6 other women who received a daily dosage of 480 mg, the peak milk level averaged 4 mg/L and the trough averaged 1.5 mg/L. The authors calculated that a breastfed infant would receive a daily dosage of 0.75 mg with a maternal dosage of 320 mg daily and 1.7 mg with a maternal dosage of 480 mg.[1,2]

Forty women in the early postpartum period received oral co-trimoxazole and had milk levels measured several times daily for 5 days. After trimethoprim doses of 320 mg daily, average milk levels were about 2 mg/L. Milk levels increased to about 3 mg/L by day 5 of therapy. In 10 other women who received trimethoprim 480 mg daily, average milk levels were only slightly higher.[3] With the usual dose of trimethoprim 320 mg daily, an exclusively breastfed infant would be expected to receive 0.45 mg/kg daily of trimethoprim. This is very low in comparison to the established treatment dosages of 8 mg/kg daily for infants over 2 months of age.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

In one study, no adverse effects were noted in infants during 4 days of maternal therapy with co-trimoxazole.[1]

In a telephone follow-up study, 12 nursing mothers reported taking co-trimoxazole (dosage unspecified). Two mothers reported poor feeding in their infants. Diarrhea was not reported among the exposed infants.[4]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Ciprofloxacin, Levofloxacin, Nitrofurantoin

### References

1 Arnauld R, Soutoul JH, Gallier J, et al. Study on the passage of trimethoprim into mother's milk. Ouest Med 1972;25:959-64.
2 Borderon E, Soutoul JH, Borderon JC, et al. Excretion of antibiotics in human milk. Med Mal Infect 1975;5:373-6.
3 Miller RD, Salter AJ. The passage of trimethoprim/sulfamethoxazole into breast milk and its significance. In, Daikos CK, ed. Progress in Chemotherapy. Antibacterial chemotherapy 1974;1:687-91.
4 Ito S, Blajchman A, Stephenson M, et al. Prospective follow-up of adverse reactions in breast-fed infants exposed to maternal medication. Am J Obstet Gynecol 1993;168:1393-9.8498418

## Substance Identification

### Substance Name

Trimethoprim

### CAS Registry Number

738-70-5

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents, Urinary

Antibacterial Agents

Folic Acid Antagonists